# Xenon Xe 133

CASRN: 14932-42-4

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of xenon Xe 133 as a diagnostic agent. Because of its low systemic bioavailability after inhalation, the International Commission on Radiological Protection and other experts state breastfeeding need not be interrupted after administration of xenon Xe 133.[1-3]

### Drug Levels

Xenon 133 is a beta emitter with a physical half-life of 5.2 days, a photopeak of 81 keV, and beta-decay.[2] Because of the poor solubility of xenon Xe 133, the amount that enters the venous circulation after inhalation is negligible. The small amount of xenon Xe 133 gas that passes into the venous circulation returns rapidly to the lungs to be exhaled.

Maternal Levels. Excretion of nonradioactive xenon in breastmilk was studied in 2 women who underwent about 1 hour of xenon anesthesia with a 65 to 69% inhaled xenon concentration. One mother consumed 8.3 L of xenon and the other had consumed 10 L during the procedure. Milk samples taken at 90 and 300 minutes after extubation contained no detectable xenon.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stabin MG, Breitz HB. (2000). Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med.
2 Parker JA, Coleman RE, Grady E, et al. (2012). SNM practice guideline for lung scintigraphy 4.0. J Nucl Med Technol.
3 Mattsson S, Johansson L, Leide Svegborn S, et al. (2015). Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP.
4 Stuttmann R, Schafer C, Hilbert P, et al. (2010). The breast feeding mother and xenon anaesthesia: four case reports. Breast feeding and xenon anaesthesia. BMC Anesthesiol.

## Substance Identification

### Substance Name

Xenon Xe 133

### CAS Registry Number

14932-42-4

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Xenon Radioisotopes

Diagnostic Agents